# Asparaginase

CASRN: 9015-68-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of asparaginase during breastfeeding. Because aspariginase is a large protein molecule with a molecular weight of about 140,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] However, the manufacturer recommends that breastfeeding be discontinued during asparaginase therapy and for 1 week after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Asparaginase

### CAS Registry Number

9015-68-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzymes